# Emtricitabine

CASRN: 143491-57-0

## Drug Levels and Effects

### Summary of Use during Lactation

Emtricitabine has been studied relatively well during breastfeeding, and it is sometime used in treating HIV-positive mothers who are breastfeeding. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2]

For use in treating maternal hepatitis B, no difference exist in infection rates between breastfed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives hepatitis B immune globulin and hepatitis B vaccine at birth. Mothers with hepatitis B are encouraged to breastfeed their infants after their infants receive these preventative measures.[3,4] With HIV pre-exposure prophylaxis with tenofovir 200 mg and emtricitabine 300 mg, infants receive only about 0.5% of a therapeutic dose of emtricitabine. During long-term maternal use of emtricitabine 200 mg daily, breastfed infants usually have undetectable blood concentrations.

### Drug Levels

Maternal Levels. Five exclusively breastfeeding mothers received oral emtricitabine 200 mg plus tenofovir 300 mg and nevirapine 200 mg at the start of labor, then oral emtricitabine 200 mg and tenofovir 300 mg daily for 7 days postpartum. A total of 16 concurrent maternal blood and milk samples were collected on days 1, 2, 3, and 7 postpartum between 10 minutes and 21 hours after the mothers' doses. Median peak and trough emtricitabine concentrations in breastmilk were 679 mcg/L and 177 mcg/L, respectively. The authors estimated that an exclusively breastfed infant would receive about 2% of the proposed infant dose for emtricitabine and achieve infant serum concentrations that might result in the emergence of viral resistance to emtricitabine.[5]

Fifty HIV-negative women who were nursing their infants were given pre-exposure prophylaxis daily with the combination of tenofovir disoproxil fumarate 300 mg and emtricitabine 200 mg by directly observed therapy for 10 days. On days 7 and 10 of therapy, peak milk samples were obtained 1 to 2 hours after a dose and trough samples were obtained 23 to 24 hours after the previous dose. The median peak milk emtricitabine concentration was 212.5 mcg/L and the trough concentration was 183 mcg/L. These values represent an estimated daily dosage of 27.5 to 31.5 mcg/kg, which is approximately 0.5% of the proposed infant therapeutic dosage.[6]

Emtricitabine was measured in 6 HIV-positive nursing mothers after a 300 mg dose during ongoing therapy. The peak breastmilk level was 872 mcg/L (range 696 to 1063 mcg/L) at a median of 3 hours.[7]

Sixteen Nigerian women took emtricitabine 200 mg once daily as part of a combination therapy for HIV. Expressed milk samples were taken before the dose and at 0.5, 1, 2, 4, 8 and 12 hours after the dose. The median peak breastmilk concentration from dried breastmilk spots was 843 mcg/L (IQR 702 to 1132 mcg/L) at a median of 4 hours after the dose (IQR 2 to 8 hours).[8]

Sixteen mothers taking emtricitabine 200 mg once daily provided 29 milk samples at a median of 15.5 hours after a dose. The median drug concentration in milk was 803 mcg/L, which resulted in an estimated infant dosage of 120 mcg/kg daily and a relative infant dose of 4% of the maternal weight-adjusted dosage.[9]

A clinical trial compared the dapivirine vaginal ring 25 mg monthly to PrEP consisting of 200 mg emtricitabine and 300 mg tenofovir disoproxil fumarate daily as prophylaxis against HIV infection. In women randomized to PrEP (n = 48), emtricitabine concentrations in breastmilk averaged 656 ng/L during the first week of use and trended downward to 558.5 ng/L in the third month of use. At 2 weeks after discontinuation, the milk emtricitabine concentration was below the level of quantification (<5 mcg/L) in all women.[10]

Infant Levels. Fifty HIV-negative women who were nursing their infants were given pre-exposure prophylaxis daily with the combination of tenofovir disoproxil fumarate 300 mg and emtricitabine 200 mg by directly observed therapy for 10 days. A single infant blood sample was obtained after the mother's 7th dose. Of 49 infant blood samples collected, 47 had detectable concentrations of emtricitabine, with a median plasma concentration of 13.2 mcg/L. Infants under 13 weeks of age had a statistically significant lower plasma concentration than those who were 13 weeks of age or older, 16.6 mcg/L and 10.5 mcg/L, respectively.[6]

Emtricitabine 300 mg daily was given to 6 HIV-positive nursing mothers. One breastfed infant had a detectable emtricitabine serum level of 17.5 mcg/L.[7]

Sixteen Nigerian women took emtricitabine 200 mg once daily as part of a combination therapy for HIV. Their exclusively breastfed infants were fed on demand and had blood samples taken at 2 and 8 hours after the dose. Dried blood spots were analyzed and only 3 samples contained quantifiable (>16.6 mcg/L) blood levels of 17.5, 18.8, and 19.4 mcg/L.[8]

Eleven serum concentrations were obtained from breastfed infants whose mothers were taking emtricitabine 200 mg daily, although the extent of breastfeeding was not sated. Infant serum concentrations taken 2 to 20 hours after maternal drug intake at 1 month of age ranged from 0 to 49 mcg/L.[9]

A clinical trial compared the dapivirine vaginal ring 25 mg monthly to PrEP consisting of 200 mg emtricitabine and 300 mg tenofovir disoproxil fumarate daily as prophylaxis against HIV infection. In the infants of mothers randomized to PrEP (n = 48), there were nine detectable concentrations of the emtricitabine triphosphate active metabolite in dried blood spots from five infants, with one infant having four timepoints above the lower level of quantification (<0.125 pmol/punch).[10]

### Effects in Breastfed Infants

In a study of 50 infants breastfed by HIV-negative women who were given pre-exposure prophylaxis daily with the combination of tenofovir disoproxil fumarate 300 mg and emtricitabine 200 mg by directly observed therapy for 10 days, 2 infants reportedly had diarrhea lasting 2 to 3 days. No other side effects were reported.[6]

A clinical trial compared the dapivirine vaginal ring 25 mg monthly to PrEP consisting of 200 mg emtricitabine and 300 mg tenofovir disoproxil fumarate daily as prophylaxis against HIV infection. In the infants of mothers randomized to PrEP (n = 48), no infants had reports of adverse events attributable to maternal therapy.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis B) Lamivudine, Tenofovir

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021. https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024. https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 Visvanathan K, Dusheiko G, Giles M, et al. Managing HBV in pregnancy. Prevention, prophylaxis, treatment and follow-up: Position paper produced by Australian, UK and New Zealand key opinion leaders. Gut 2016;65:340-50.26475631
4 Dionne-Odom J, Tita AT, Silverman NS. #38: Hepatitis B in pregnancy screening, treatment, and prevention of vertical transmission. Am J Obstet Gynecol 2016;214:6-14.26454123
5 Benaboud S, Pruvost A, Coffie PA, et al. Concentrations of tenofovir and emtricitabine in breast milk of HIV-1-infected women in Abidjan, Cote d'Ivoire, in the ANRS 12109 TEMAA Study, step 2. Antimicrob Agents Chemother 2011;55:1315-7.21173182
6 Mugwanya KK, Hendrix CW, Mugo NR, et al. Pre-exposure prophylaxis use by breastfeeding HIV-uninfected women: A prospective short-term study of antiretroviral excretion in breast milk and infant absorption. PLoS Med 2016;13:e1002132.27676257
7 Waitt C, Diliiy Penchala S, Olagunju A, et al. Development, validation and clinical application of a method for the simultaneous quantification of lamivudine, emtricitabine and tenofovir in dried blood and dried breast milk spots using LC–MS/MS. J Chromatogr B Analyt Technol Biomed Life Sci 2017;1060:300-7.28651173
8 Waitt C, Olagunju A, Nakalema S, et al. Plasma and breast milk pharmacokinetics of emtricitabine, tenofovir and lamivudine using dried blood and breast milk spots in nursing African mother-infant pairs. J Antimicrob Chemother 2018;73:1013-9.29309634
9 Aebi-Popp K, Kahlert CR, Crisinel PA, et al. Transfer of antiretroviral drugs into breastmilk: A prospective study from the Swiss Mother and Child HIV Cohort Study. J Antimicrob Chemother 2022;77:3436-42.36177836
10 Noguchi LM, Owor M, Mgodi NM, et al. Safety and drug quantification of the dapivirine vaginal ring and oral pre-exposure prophylaxis in breastfeeding mother-infant pairs (MTN-043): a phase 3B, open-label, randomised trial. Lancet HIV 2025.39954697

## Substance Identification

### Substance Name

Emtricitabine

### CAS Registry Number

143491-57-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

Reverse Transcriptase Inhibitors